# Peppermint

## Drug Levels and Effects

### Summary of Use during Lactation

Peppermint (Mentha x piperita) contains menthol, menthone, menthyl acetate as major ingredients. Minor ingredients include 1,8-cineole (eucalyptol), pulegone, caffeic acid, flavonoids, tannins, and bitter substances. Topical peppermint gel and solutions have been studied for the prevention of pain and cracked nipples and areolas in nursing women. The peppermint preparations were more effective than placebo and expressed breastmilk, and about as effective as lanolin in most,[1–7] but not all studies.[8] A meta-analysis of controlled trials concluded peppermint was significantly reduced nipple trauma in lactating mothers.[6] Some mothers in Türkiye reportedly use mint to increase their milk supply and improve the taste and quality of their milk.[9,10] However, peppermint is also used to suppress milk production, which has been demonstrated in vitro and in animals with high doses.[11,12] Menthol and 1,8-cineol are excreted into breastmilk in small quantities; the excretion of other components has not been studied. Peppermint is “generally recognized as safe” (GRAS) as a food by the U.S. Food and Drug Administration. Large doses can cause heartburn, nausea and vomiting. Allergic reactions, including headaches, have been reported to menthol. If peppermint is used on the nipples, it should be used after nursing and wiped off before the next nursing.

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements is available elsewhere on the LactMed Web site.

### Drug Levels

The flavor of peppermint comes primarily from its menthol content, but 1,8-cineol (eucalyptol) is also present.

Maternal Levels. Eighteen lactating women were given 100 mg of l-menthol in a capsule on 3 test days. Milk samples were collected every 2 hours for 8 hours starting at the time of ingestion. Menthol was detected in milk at all collection times, with the average concentrations of 2.1 mcg/L at 0 hours, 4.9 mcg/L at 2 hours, 5.9 mcg/L at 4 hours, 5.8 mcg/L at 6 hours and 4.1 mcg/L at 8 hours after the dose. The average peak menthol concentration in milk was 8 mcg/L. Only small amounts of menthol glucuronide metabolites were present in the milk samples.[13]

Twelve nursing mothers who were 19 weeks to 19 months postpartum ingested 100 mg of 1,8 cineole in the form of delayed-release capsules (Soledum-Klosterfrau Vertriebs GmbH, Germany) that release the drug in the intestine. Then they pumped 1 to 4 milk samples at the time they perceived the smell of eucalyptus on their breath which had been previously shown to be approximately concurrent. A total of 21 milk samples were obtained. Odor was rated by a panel of 3 to 5 experts as either smelling like eucalyptus or not. Fourteen of the samples had a distinct eucalyptus-like odor. Chemical analysis of the positive odor tests found 1,8-cineole in concentrations from 70 to about 2090 mcg/kg of milk, most in the range of 100 to 500 mcg/kg of milk. Samples with negative odor tests contained concentrations in the range of 0.98 to about 20.23 mcg/kg of milk. In one woman who donated 3 samples, the highest concentration of 71 mcg/kg occurred at 1.5 hours after ingestion, with concentrations of 1 mcg/kg before ingestion and 15 mcg/kg at 9.5 hours after ingestion.[14] Eight women had their milk analyzed for 1,8-cineole metabolites. Ten metabolites and several enantiomers of these metabolites were detected.[14,15]

Eighteen nursing mothers who were nursing their infants of 8 to 53 weeks of age were served a curry dish that contained an average of 394 mcg of 1,8-cineole. Baseline 1,8-cineole concentrations in milk averaged 1.44 mcg/L (range 0.07 to 7.57 mcg/L). Milk samples contained 1,8-cineole in concentrations of 0.19 to 7.41 mcg/L at 1 hour after eating, 0.33 to 7.86 mcg/L at 2 hours after eating and 0.22 to 3.33 mcg/L at 3 hours after eating.[16]

Twenty nursing mothers who were nursing their infants with a mean of 25 weeks of age were served a standardized curry dish that contained an average of 400 mcg of 1,8-cineole. Mothers donated one milk sample each before and 1, 2, 3, 4, 5, 6, and 8 h after the eating the curry dish. 1,8-Cineole reached its maximum concentration in milk after 1 hour in three participants, after 2 hours in four participants, after 3 hours in three participants, after 4 hours in three participants after 5 hours in three participants, after 6 hours in three participants and after 8 hours in one participant. Peak milk 1,8-cineole concentrations ranged from 0.98 to 10.1 mcg/L.[17]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Nursing mothers who were participating in an experiment on the excretion of 1,8-cineole in breastmilk took a 100 mg capsule of 1,8-cineole orally. Although instructed not to, 12 mothers breastfed their infants during the experiment. Mothers reported that none of their infants refused their milk or breastfed less than usual. Two mothers felt that their infants were more agitated a few hours after breastfeeding. A third mother reported that the infant stopped nursing from time to time and “looked puzzled” but resumed nursing. Upon repeating the experiment 6 weeks later, the infant did not react in an unusual way during breastfeeding.[18]

### Effects on Lactation and Breastmilk

Peppermint has been used to suppress lactation;[11] however, no clinical trials have been found that demonstrate lactation suppression. Menthol can suppress milk production in cell culture and in mice.[12] In humans menthol is rapidly converted to its glucuronide metabolite after oral ingestion.[19] It is not clear if the glucuronide has any lactation suppressing effect or if typical peppermint intake would be adequate to suppress lactation in humans.

### References

1 Sayyah Melli M, Rashidi MR, Delazar A, . Effect of peppermint water on prevention of nipple cracks in lactating primiparous women: A randomized controlled trial. Int Breastfeed J 2007;2:7.17442122
2 Melli MS, Rashidi MR, Nokhoodchi A, . A randomized trial of peppermint gel, lanolin ointment, and placebo gel to prevent nipple crack in primiparous breastfeeding women. Med Sci Monit 2007;13:CR406–11.17767120
3 Akbari SA, Alamolhoda SH, Baghban AA, . Effects of menthol essence and breast milk on the improvement of nipple fissures in breastfeeding women. J Res Med Sci 2014;19:629–33.25364362
4 Shanazi M, Farshbaf Khalili, A, Kamalifard M, . Comparison of the effects of lanolin, peppermint, and dexpanthenol creams on treatment of traumatic nipples in breastfeeding mothers. J Caring Sci 2015;4:297–307.26744729
5 Bolourian M, Dadgar H, Aqadousti R, . The effect of peppermint on the treatment of nipple fissure during breastfeeding: A systematic review. International Journal of Pediatrics (Mashhad) 2020;8:11527–35. doi:10.22038/ijp.2020.46558.3784
6 Shetty AP, Halemani K, Issac A, . Effectiveness of the application of lanolin, aloe vera, and peppermint on nipple pain and nipple trauma in lactating mothers: A systematic review and meta-analysis. Matern Child Health J 2024;28:2013–25.39436586
7 Ismail NIAA, Hafez SK, Ghaly AS. Effect of breast milk, peppermint water and breast shell on treatment of traumatic nipple in puerperal lactating mothers. International Journal of Novel Research in Healthcare and Nursing 2019;6:692–709. https://www.researchgate.net/publication/337464666
8 Bahar TG, Oshvandi K, Masoumi SZ, . A comparative study of the effects of mint tea bag, mint cream, and breast milk on the treatment of cracked nipple in the lactation period: A randomized clinical trial study. Iran J Neonatol 2018;9:72–9. doi:10.22038/ijn.2018.30078.1409
9 Kaygusuz M, Gümüştakım RŞ, Kuş C, . TCM use in pregnant women and nursing mothers: A study from Turkey. Complement Ther Clin Pract 2021;42:101300.33412511
10 Erarslan ZB, Kültür S. Medicinal plants traditionally used to increase breast milk in Turkey: An ethnobotanical review. J Herbal Med 2024;44:100849. doi:10.1016/j.hermed.2024.100849
11 Johnson HM, Eglash A, Mitchell KB, . ABM Clinical Protocol #32: Management of hyperlactation. Breastfeed Med 2020;15:129–34.32031417
12 Suzuki N, Tsugami Y, Wakasa H, . Menthol from Mentha piperita suppresses the milk production of lactating mammary epithelial cells in vivo and in vitro. Mol Nutr Food Res 2020:e2000853.
13 Hausner H, Bredie WL, Mølgaard C, . Differential transfer of dietary flavour compounds into human breast milk. Physiol Behav 2008;95:118–24.18571209
14 Kirsch F, Beauchamp J, Buettner A. Time-dependent aroma changes in breast milk after oral intake of a pharmacological preparation containing 1,8-cineole. Clin Nutr 2012;31:682–92.22405404
15 Kirsch F, Buettner A. Characterisation of the metabolites of 1,8-cineole transferred into human milk: Concentrations and ratio of enantiomers. Metabolites 2013;3:47–71.24957890
16 Debong MW, N’Diaye K, Owsienko D, . Dietary linalool is transferred into the milk of nursing mothers. Mol Nutr Food Res 2021;65:e2100507.34658145
17 Debong MW, Homm I, Gigl M, . Curry-odorants and their metabolites transfer into human milk and urine. Mol Nutr Food Res 2024;68:e2300831.38602198
18 Kirsch F, Horst K, Rohrig W, . Tracing metabolite profiles in human milk: Studies on the odorant 1,8-cineole transferred into breast milk after oral intake. Metabolomics 2013;3:47–71. doi:10.1007/s11306-012-0466-9
19 Gelal A, Jacob P, 3rd, Yu L, . Disposition kinetics and effects of menthol. Clin Pharmacol Ther 1999;66:128–35.10460066

## Substance Identification

### Substance Name

Peppermint

### Scientific Name

Mentha x piperita

### Drug Class

Breast Feeding

Lactation

Milk, Human

Complementary Therapies

Food

Phytotherapy

Plants, Medicinal

Gastrointestinal Agents